# Sucroferric Oxyhydroxide

CASRN: 8047-67-4

## Drug Levels and Effects

### Summary of Use during Lactation

Because sucroferric oxyhydroxide is not absorbed orally, it will not reach the bloodstream of the infant or cause any adverse effects in breastfed infants.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Aluminum Hydroxide, Calcium Acetate, Calcium Carbonate, Ferric Citrate, Sevelamer

## Substance Identification

### Substance Name

Sucroferric Oxyhydroxide

### CAS Registry Number

8047-67-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Ferric Compounds

Iron Compounds